# Baloxavir

CASRN: 1985605-59-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of baloxavir during breastfeeding. Because baloxavir is 93% bound to plasma proteins, the amount in milk is likely to be low. If baloxavir is required by the mother, it is not a reason to discontinue breastfeeding, but an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Oseltamivir, Zanamivir

## Substance Identification

### Substance Name

Baloxavir

### CAS Registry Number

1985605-59-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Enzyme Inhibitors